# Triclabendazole

CASRN: 68786-66-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of triclabendazole during breastfeeding. Because of protein binding of 96% to 99% for the drug and metabolites, exposure of the breastfed infant is likely to be low.

### Drug Levels

Triclabendazole is metabolized into its active sulfoxide metabolite, which is further metabolized to the active sulfone metabolite. These drugs have half-lives of 8, 14, and 11 hours, respectively.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Triclabendazole

### CAS Registry Number

68786-66-3

### Drug Class

Breastfeeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Antiplatyhelmintic Agents